# Ceftazidime and Avibactam

CASRN: 1192500-31-4 78439-06-2

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that ceftazidime produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Avibactam has not been studied in nursing mothers. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with cephalosporins, but these effects have not been adequately evaluated. Ceftazidime-avibactam is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. Ceftazidime 2 grams was given to 11 women intravenously every 8 hours for 5 days. The average trough milk level was 3.8 mg/L before the next dose, 5.2 mg/L 1 hour after the dose and 4.5 mg/L at 3 hours after the dose. These differences were not statistically significant. The average drug concentrations in milk were 3.9 mg/L for samples before the seventh dose and 4.9 mg/L in milk samples after the seventh dose, but this difference was not statistically significant. There was no correlation between the mother's weight and the ceftazidime milk levels.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Blanco JD, Jorgensen JH, Castaneda YS, et al. (1983). Ceftazidime levels in human breast milk. Antimicrob Agents Chemother.

## Substance Identification

### Substance Name

Ceftazidime and Avibactam

### CAS Registry Number

1192500-31-4 78439-06-2

### Drug Class

Breast Feeding

Lactation

Anti-Infective Agents

Antibacterial Agents

Cephalosporins